# Interferon Gamma-1b

CASRN: 98059-61-1

## Drug Levels and Effects

### Summary of Use during Lactation

Interferon gamma is a normal component of human milk. No data are available on the use of exogenous interferon gamma 1b during breastfeeding. However, the amounts of the similar drugs, interferon alfa and interferon beta-1a, excreted into milk are very low. Any interferon in breastmilk is probably destroyed in the infant's gastrointestinal tract and not absorbed, except perhaps in neonates.

### Drug Levels

Maternal Levels. Measurements of the colostrum 6 mothers of preterm infants found an average of 2 ng/L of interferon gamma; two mothers of full-term infants had an average of 2.2 ng/L. At over 30 days postpartum, milk of 3 mothers of preterm infants contained 2.6 ng/L of interferon gamma; the milk of 28 mothers of full-term infants contained an average of 0.7 ng/L.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Srivastava MD, Srivastava A, Brouhard B, et al. Cytokines in human milk. Res Commun Mol Pathol Pharmacol 1996;93:263-87.8896040

## Substance Identification

### Substance Name

Interferon Gamma-1b

### CAS Registry Number

98059-61-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Immunologic Adjuvants